# Cisplatin

CASRN: 15663-27-1

## Drug Levels and Effects

### Summary of Use during Lactation

After cisplatin administration to nursing mothers, excretion of platinum into milk occurs. The exact forms and toxicities of platinum excreted into breastmilk are not known. The nursing infant would receive platinum compounds orally rather than intravenously and oral absorption of platinum compounds by infants is not known. Platinum in milk may increase with repeated courses of chemotherapy. Most sources consider that mothers receiving antineoplastic therapy should not breastfeed, especially with alkylating agents such as cisplatin.[1] It is probably not safe to breastfeed during cisplatin therapy, and breastfeeding should be discontinued. Resuming breastfeeding 3 weeks after the last dose of cisplatin has been done safely in one case.

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.

### Drug Levels

Maternal Levels. Platinum was not detected (<100 mcg/L) in the milk of one patient at any time after an IV infusion of 100 mg/sq. m (130 mg) of cisplatin.[3]

In another patient, trough milk platinum was 900 mcg/L at 19.5 hours after her second daily dose of cisplatin 20 mg/sq. m infused intravenously over 4 hours. The simultaneous plasma platinum level was 800 mcg/L.[4] Note: the original report stated a cisplatin dose of 30 mg/sq. m, but this was later corrected to 20 mg/sq. m in a published erratum.

A patient was given cisplatin 60 mg/sq. m (100 mg) infused intravenously over 3 hours. Samples from two cycles of therapy found average peak milk platinum concentrations of about 125 mcg/L occurred 30 minutes after the dose and about 112 mcg/L at 18 hours after the dose. Milk platinum levels were about 10% of simultaneous plasma levels at all time points over the 18-hour sampling periods of two cycles.[5]

Three patients with cervical cancer received cisplatin 20 mg/sq. m during pregnancy as part of their treatment. All women had a cesarean section and hysterectomy between 31 and 35 weeks of gestation, followed by another course of chemotherapy. Breastmilk samples “in the first days of lactation” were obtained and analyzed, although the time since the last cisplatin dose and the time since surgery were not specified. Cisplatin concentrations in breastmilk samples were 0.2, 1.4, and 5.5 mg/L, which were 0.9%, 2.3% and 9% of concentrations in maternal blood at the time of surgery.[6]

Two women were treated with unspecified doses of cisplatin for treatment of cervical cancer every 2 weeks during pregnancy. The time of the last dose before delivery was not clearly specified in the abstract. Breastmilk samples were obtained daily on days 1 to 4 postpartum. Cisplatin was measured by flameless atomic absorption spectrophotometry. Platinum was undetectable (lower limit of assay not specified) in all of the samples.[7]

A woman was given her first dose of 70 mg (40 mg/sq. m) of cisplatin intravenously at 6 weeks postpartum for treatment of cervical cancer discovered during pregnancy. Fifteen milk samples were obtained between 4 and 70 hours after the dose. Total platinum was measured in milk. The first sample at 4.25 hours after the dose contained about 16 mcg/L of platinum. Concentrations fell with a half-life of 10.2 hours until 17 hours after the dose. Between 17 and 57 hours after the dose, platinum was detectable (>2.5 mcg/L), but not quantifiable (<5 mcg/L) in milk. Platinum was undetectable (<2.5 mcg/L) at 66 and 70 hours after the dose. The authors estimated that a breastfed infant would be exposed systemically to between 0.08 and 0.12% of a therapeutic dose and that resumption of breastfeeding would be possible at 72 hours after a dose of this size.[8]

A breastfeeding woman was started on cisplatin 70 mg intravenously once a week for 3 weeks for invasive squamous cell carcinoma at 5 months postpartum. She pumped her milk 3 to 4 times daily and discarded it for the first 5 days after each dose and continued to collect milk for several months. Platinum elimination from milk was biphasic. A milk total platinum concentration of about 7 mcg/L was found on day 11. The concentration decreased to 0.6. mcg/L on day 96 and then increased again by day 129 to about 5 mcg/L. Platinum was detectable in milk for at least 159 days after the first dose.[9]

A postpartum patient was diagnosed with an ovarian germ cell tumor. Her treatment consisted of 4 cycles of BEP (bleomycin, etoposide on day 1 and cisplatin 90 mg on days 1 and 2), with the cycle repeated every 21 days. Using an electric pump, she collected 98 complete 24-hour samples of breastmilk after chemotherapy that were analyzed for platinum. Reported cisplatin concentrations in the milk samples were calculated based on the measured platinum concentrations using the molecular weight of cisplatin with the assumption that all measured platinum was cisplatin. Peak milk levels after the first round of chemotherapy were about 44 mcg/L; peak levels increased to about 46 mcg/L after the second round and to about 62 mcg/L in the fourth round. After 4 rounds of chemotherapy, milk platinum levels remained elevated for more than 10 days. The authors calculated the time for the milk concentration to reach a relative infant dosage (RID) level below 1% to be 14 days after the third cycle; however, the actual platinum species in milk were not determined.[10]

A woman was diagnosed with cervical cancer at 20 weeks of gestation and had a cesarean delivery at 28 weeks when therapy was begun. Cisplatin was administered at a dose of 40 mg sq. m (55 mg) weekly, for a total of six cycles. Fifty-seven milk samples were collected from the 5th administration through 20 days after the completion of the 6th cycle. Additionally, single milk samples were collected before starting cisplatin and before the 4^th^ dose. The patient had a milk platinum concentration of 0.13 mcg/L before therapy began, probably from environmental exposure. The milk concentrations just before the 4^th^ dose and 7 hours before the 6^th^ dose were 10.6 mcg/L and 11.1 mcg/L, respectively. Immediately after administration, lactalbumin-bound platinum increased, but disappeared within 6 hours, probably due to distribution and elimination by the mother. The peak platinum concentration was 44.1 mcg/L at 1 hour after the 6th dose. The elimination half-life of platinum in milk was calculated to be 990.2 hours or 41.3 days. Platinum was in the form of high molecular weight species after being digested in simulated gastric fluid. After further simulated intestinal digestion with pancreatin and bile extract in a mixed salt solution, no free cisplatin was detected. Numerous low-molecular-weight species of unknown toxicity were detected, but no free platinum was found.[11]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two women were treated with unspecified doses of cisplatin for treatment of cervical cancer every 2 weeks during pregnancy. They both breastfed their newborn infants. Follow-up examinations of the infants, including Bayley scale test, neurology, and echocardiography at age of 20 and 35 months revealed normal findings.[7]

A 20-week preterm infant began breastfeeding more than 20 days after the mother’s 6th and final cisplatin dose of 40 mg sq. m (55 mg) weekly, for a total of six cycles. The infant had a lower body weight (7.4 kg) than average at 1 year and 2 months of age because of being born prematurely, but there were no major concerns regarding development.[11]

### Effects on Lactation and Breastmilk

A study of adolescent males who had received chemotherapy for childhood malignancies found that having received cisplatin was associated with elevated serum prolactin concentrations.[12] Another study of survivors of testicular cancer found that about 6% of those treated with cisplatin had abnormally high prolactin levels and 2% had abnormally low prolactin levels.[13]

A telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 chemotherapy cycles compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 3 women who received a cisplatin-containing regimen, 1 had breastfeeding difficulties.[14]

### References

1 Pistilli B, Bellettini G, Giovannetti E, . Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Urbaniak C, McMillan A, Angelini M, . Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
3 Egan PC, Costanza ME, Dodion P, . Doxorubicin and cisplatin excretion into human milk. Cancer Treat Rep 1985;69:1387-9.4075315
4 de Vries EG, van der Zee AG, Uges DR, . Excretion of platinum into breast milk. Lancet 1989;1:497.
5 Ben-Baruch G, Menczer J, Goshen R, . Cisplatin excretion in human milk. J Natl Cancer Inst 1992;84:451-2.1538424
6 Lanowska M, Kohler C, Oppelt P, . Addressing concerns about cisplatin application during pregnancy. J Perinat Med 2011;39:279-85.21391877
7 Tesfaye H, Halaska MJ, Branova P, . Breast-fed infants whose mothers were on platinum based chemotherapy: Cases with promising outcomes. Ther Drug Monit 2013;35:693. doi:10.1097/FTD.0b013e3182a8ef2b
8 Hays KE, Ryu RJ, Swisher EM, . Duration of cisplatin excretion in breast milk. J Hum Lact 2013;29:469-72.23492761
9 Canale S, Duffy J, Chang CH, . Prolonged excretion of platinum in human breast milk after cisplatin therapy. Clin Lact (Amarillo) 2019;10:183-7. doi:10.1891/2158-0782.10.4.183
10 Damoiseaux D, Calpe S, Rosing H, . Presence of 5 chemotherapeutic drugs in breast milk as a guide for the safe use of chemotherapy during breastfeeding: Results from a case series. Clin Pharmacol Ther 2022;112:404-10.35486426
11 Tanaka YK, Yamazaki K, Yomogita N, . Evaluation of platinum transfer to breast milk in cervical cancer patient undergoing cisplatin-based chemotherapy. Biol Trace Elem Res 2026;204:6317-25.42034865
12 Siimes MA, Ropponen P, Aalberg V, . Prolactinemia in adolescent males surviving malignancies in childhood: Impaired dating activity. J Adolesc Health 1993;14:543-7.8312290
13 Wiechno P, Demkow T, Kubiak K, . The quality of life and hormonal disturbances in testicular cancer survivors in cisplatin era. Eur Urol 2007;52:1448-54.17544206
14 Stopenski S, Aslam A, Zhang X, . After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91-7.28170295

## Substance Identification

### Substance Name

Cisplatin

### CAS Registry Number

15663-27-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Platinum Compounds